# Diflunisal

CASRN: 22494-42-4

## Drug Levels and Effects

### Summary of Use during Lactation

The small amounts of diflunisal in milk do not appear to pose a serious risk to breastfeeding infants. However, a shorter-acting agent may be preferred, especially while nursing a newborn or preterm infant.

### Drug Levels

Maternal Levels. Review articles report that milk levels are 2 to 7% of simultaneous maternal serum levels after 7 days of administration of 125 or 250 mg twice daily; however, no study details are provide.[1,2] This would represent milk levels ranging from 0.3 to 0.9 mg/L with a dose of 125 mg daily and 0.8 to 2.7 mg/L with a dose of 250 mg daily.

Infant Levels. Relevant published information was not found as of the revision date.

### Effects in Breastfed Infants

Relevant published information was not found as of the revision date.

### Effects on Lactation and Breastmilk

Relevant published information was not found as of the revision date.

### Alternate Drugs to Consider

Acetaminophen, Celecoxib, Diclofenac, Flurbiprofen, Ibuprofen, Indomethacin, Naproxen, Piroxicam

### References

1 Steelman SL, Breault GO, Tocco D, . Pharmacokinetics of MK-647, a novel salicylate. Clin Pharmacol Ther 1975;17:245. doi:10.1002/cpt1975172228
2 Tempero KF, Cirillo VJ, Steelman SL. Diflunisal: chemistry, toxicology, experimental and human pharmacology. In, Diflunisal: new perspectives in analgesia. Royal Soc Med Int’l Con Sym Ser Huskisson EC, Caldwell, ADS, eds 1979;6:3–4.

## Substance Identification

### Substance Name

Diflunisal

### CAS Registry Number

22494-42-4

### Drug Class

Breast Feeding

Lactation

Milk, Human

Analgesic Agents

Anti-inflammatory Agents, Nonsteroidal